# Crotalidae Immune F(ab')2 (Equine)

## Drug Levels and Effects

### Summary of Use during Lactation

Crotalidae Immune F(ab')2 (equine) is used to treat crotalid envenomation (rattlesnakes, copperheads, cottonmouths, water moccasins). No information is available on the clinical use of crotalidae antivenin, polyvalent (equine) during breastfeeding. Because it is a mixture of large protein molecule, the amounts in milk are likely to be very low.[1] They are also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] The possibility of sensitization to horse proteins should be kept in mind.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Crotalidae Immune F(ab')2 (Equine)

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antivenins